# Parsley

## Drug Levels and Effects

### Summary of Use during Lactation

Parsley (Carum petroselinum) leaf, seed, and root contain the volatile oils apiol and myristicin, which is pharmacologically active, as well as flavonoids, beta-phellandrene, bergapten, and vitamins A and C. Warm compresses or poultices of parsley have been used to treat breast engorgement and mastalgia.[1,2] Oral capsules containing sage and parsley capsules are said to decrease milk flow; however, no scientifically valid clinical trials support this use. Some mothers in Türkiye reportedly use parsley to increase their milk supply.[3] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] No data exist on the excretion of any components of parsley into breastmilk or on the safety and efficacy of parsley nursing mothers or infants. Parsley is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Adverse reactions are primarily allergic, including cross reactions to other members of the Apiaceae family, such as carrot, celery, and fennel. The essential oil should not be used because of potential toxicity of its apiol and myristicin content.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Oral capsules containing sage and parsley capsules are said to decrease milk flow;[6-8] however, no scientifically valid clinical trials support this use.

One hundred fifty-eight mothers in Iran of who reported difficulty in breastfeeding were given either a proprietary mixture of herbs (Shirafza Drop) or a chlorophyll solution as a placebo. The herbal mixture contained the purported galactogogues fennel, anise, cumin, black seed, and parsley. Infant ages ranged between 0 and 6 months and they were exclusively breastfed. Weight gain of the infants was measured over time. No difference in infant weight gain was seen between the two groups of infants.[9] Blinding and randomization in this study is unclear.

### References

1 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165-7.9456733
2 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93-100. doi:10.1089/act.1997.3.93
3 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
4 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
5 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
6 Petrie KA, Peck MR. Alternative medicine in maternity care. Prim Care 2000;27:117-36.10739460
7 Larimore WL, Petrie KA. Drug use during pregnancy and lactation. Prim Care 2000;27:35-53.10739456
8 Eglash A. Treatment of maternal hypergalactia. Breastfeed Med 2014;9:423-5.25361472
9 Shariati M, Mamoori GA, Khadivzade T. The survey of effect of using "Shirafza Drop" by nursing mothers on weight gain (WG) of 0-6 months exclusively breastfed. Horizon Med Sci 2004;10:24-30. http://imtj.gmu.ac.ir/article-1-255-en.html

## Substance Identification

### Substance Name

Parsley

### Scientific Name

Carum petroselinum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal